# Garlic

CASRN: 8008-99-9

## Drug Levels and Effects

### Summary of Use during Lactation

Garlic (Allium sativum) contains alliin, which is metabolized by the enzyme alliinase to allicin, thought to be responsible for most of garlic's medicinal properties and odor. Garlic’s odor in milk is attributed to allyl methyl sulfide.[1] Garlic has been used to lower cholesterol and blood pressure. It has no specific indications for use during lactation in western countries. Garlic has been used as a galactogogue in India and Türkiye,[2-6] although no good scientific data could be located on its use alone as a galactogogue. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[7,8] Garlic has a long history of use as a food and medicine and is "generally recognized as safe" (GRAS) as a food flavoring by the U.S. Food and Drug Administration, including during lactation.[9] Garlic's odor is transmitted to breastmilk, which may increase infant sucking time acutely and might enhance the breastfed infant's food choices in the long term. Some mothers in Türkiye reportedly use garlic to improve the taste and quality of their milk.[4] Limited scientific data found that a few days of oral garlic supplementation caused no adverse effects in nursing mothers or infants. When used as a medicinal, garlic is generally well tolerated in adults, but gastrointestinal side effects and bad breath and body odor may occur. Garlic has anti-platelet effects and should be used cautiously by women at risk for bleeding. Garlic can cause allergies and should be avoided by persons allergic to garlic or other members of the lily family, such as hyacinth, tulip, onion, leek, and chives. Topical application of garlic can cause dermatitis and burns and should be used with caution, especially in infants. One nursing mother received severe burns to the breast from prolonged (2 days) application of a poultice of raw, crushed garlic to treat a self-diagnosed Candida infection.[10]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Mothers given placebo or 1.5 g of garlic in capsules (General Nutrition Center, Pittsburgh, PA) once daily extracted about 20 mL of breastmilk every hour for 4 hours after garlic ingestion. A panel of 11 men and women who were blinded to maternal product ingestion rated the perceived odor of garlic in each sample. Garlic odor was most strongly perceived at 2 hours after maternal garlic ingestion. The odor remained equally perceptible at 3 hours after ingestion in some mothers' milk.[11]

Six nursing mothers, 22 to 51 weeks postpartum each ate 3 grams of raw garlic and donated 3 milk samples via breast pump, 1 before ingesting the garlic and 2 afterwards at 2 to 3 hour intervals. Garlic-derived metabolites were measured over a period of up to 5.2 hours after the ingestion of garlic. A panel of sensory evaluators identified odors present in milk samples and several known metabolites were detected in the milk by high-resolution gas chromatography-olfactometry. The panelists identified a garlic or cabbage-like odor in breast milk about 2.5 hours after maternal consumption of garlic. Out of 13 possible garlic-derived metabolites, laboratory analyses found only allyl methyl sulfide, allyl methyl sulfoxide, and allyl methyl sulfone in breastmilk. Only allyl methyl sulfide had a garlic-like odor; the other two metabolites were odorless. Measured levels of the metabolites had peak concentrations between 2 and 3 hours after maternal garlic ingestion.[12]

Twelve nursing mothers who were 9 to 41 weeks (mean 22 weeks) postpartum donated 18 sets of breastmilk samples after consuming 3 grams of fresh, raw garlic. Each set contained 1 milk sample before ingesting garlic and 3 samples afterwards at 2- to 4-hour intervals. A slight garlic or cabbage odor of was detected at low levels in all post-ingestion milk samples by a trained panel of odor analysts. The odor was thought to be that of allyl methyl sulfide, a garlic metabolite. Additionally, allyl methyl sulfide, allyl methyl sulfoxide, and allyl methyl sulfone were analyzed in all milk samples. Peak concentrations of allyl methyl sulfide ranged from 0.6 to 4 mcg/kg human milk; peak allyl methyl sulfoxide ranged from 30 to 145 mcg/kg human milk; and peak allyl methyl sulfone ranged from 49 to 200 mcg/kg human milk. Most peak times occurred between 1 and 3.5 hours after garlic ingestion, although the peak occurred at about 5 hours post-ingestion in a few samples.[13]

Three women donated milk samples after ingesting roasted garlic and three donated milk samples after ingesting cooked (boiled) garlic. Milk samples were obtained before and at 3 times after the ingestion of garlic, at approximately 2, 4 and 6 hours after ingesting the garlic. Allyl methyl sulfide was determined to be the odorific component of milk after the ingestion of roasted garlic and appeared between 1 to 3 hours after ingestion, although it was also detected in a second peak at 5 to 7 hours after ingestion in some samples. No odoriferous components were detected after ingestion of cooked garlic. Chemical analysis also found allyl methyl sulfoxide and allyl methyl sulfone peak levels from 1 to 4 hours after ingestion of roasted and cooked garlic, although levels were lower after cooked garlic.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Maternal garlic ingestion has a reputation for causing colic in breastfed infants. Two papers tend to refute this claim. In one, 153 mothers who answered a questionnaire were no more likely to report colic in their infants in the previous week if they had ingested garlic than if they had not.[14]

In another study, mothers who were given either 1.5 grams of garlic or placebo capsules once daily in a blinded fashion for 3 days were asked if their infants had exhibited any signs of colic (were fussier, cried more or had more gas) after capsule ingestion. Four of 20 women who ingested garlic thought their infants had colic; however, 4 of 10 women who received placebo thought they had received garlic and reported colic in their infants.[15]

### Effects on Lactation and Breastmilk

Forty women who complained of an insufficient milk supply at 5 days postpartum were given a combination herbal supplement as 2 capsules of Lactare (Pharma Private Ltd., Madras, India) 3 times daily. Each capsule contained wild asparagus 200 mg, ashwagandha (Withania somnifera) 100 mg, fenugreek 50 mg, licorice 50 mg, and garlic 20 mg. By day 4 of therapy, no infants required supplementary feeding. Infants were weighed before and after each feeding on the fifth day of maternal therapy to determine the amount of milk ingested. On the day of the test weighing, infants' milk intake averaged 388 mL, and the fluid and caloric intake was considered adequate.[16] This study cannot be considered as valid evidence of a galactogogue effect of these herbs because it lacks randomization, blinding, a placebo control, and maternal instruction in breastfeeding technique. Additionally, infants were breastfed only 6 to 8 times daily, which is insufficient to maximize milk supply.

In two studies conducted by the same investigators, capsules containing 1.5 g of garlic extract (General Nutrition Center, Pittsburgh, PA) were given to nursing mothers. In the first experiment, 8 mothers receive a garlic capsule or placebo once daily in a crossover fashion. Garlic-naïve infants whose mothers ingested garlic capsules spent more time (33 vs 27 minutes) attached to the nipple during the time period of 1.5 to 3 hours after garlic ingestion when garlic odor in milk was maximal than in those whose mothers received a placebo; however, total number of nursings or total amount of milk ingestion did not differ between groups.[6] A study randomized nursing mothers to receive garlic capsules or placebo for 3 days before testing with a single capsule as in the study above. Infants who received garlic in the milk for the first time spent 30% more time nursing than after placebo. Infants who had been previously exposed to garlic in milk, did not spend more time nursing after subsequent garlic exposure in milk.[15] The authors interpreted the results of these studies as having a positive effect on infants' later food choices (i.e., being less "picky" about foods).[17]

### References

1 Qin W, Huber K, Popp M, et al. Quantification of allyl methyl sulfide, allyl methyl sulfoxide, and allyl methyl sulfone in human milk and urine after ingestion of cooked and roasted garlic. Front Nutr 2020;7:565496.33072797
2 Sayed NZ, Deo R, Mukundan U. Herbal remedies used by Warlis of Dahanu to induce lactation in nursing mothers. Indian J Tradit Knowl 2007;6:602–5. https://nopr.niscpr.res.in/handle/123456789/1009
3 Amuthavalluvan V, Devarapalli J. Indigenous knowledge and health seeking behavior among Kattunayakan: A tribe in transition. Glob J Human Soc Sci 2011;11:19–23. http://socialscienceresearch.org/index.php/GJHSS/article/view/198/161
4 Kaygusuz M, Gümüştakım RŞ, Kuş C, et al. TCM use in pregnant women and nursing mothers: A study from Turkey. Complement Ther Clin Pract 2021;42:101300.33412511
5 Mahalakshmi B, Patani J, Ekambaram G, et al. Effect of Allium sativum consumption for breast feeding among postnatal Indian mothers. Bioinformation 2023;19:698–702.37885786
6 Srinivas R, Eagappan K, Sasikumar S. The effect of naturally formulated galactogogue mix on breast milk production, prolactin level and short-term catch-up of birth weight in the first week of life. Int J Health Sci Res 2014;4:242–53. https://www.ijhsr.org/IJHSR_Vol.4_Issue.10_Oct2014/35.pdf
7 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
8 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531
9 O'Hara M, Kiefer D, Farrell K, et al. A review of 12 commonly used medicinal herbs. Arch Fam Med 1998;7:523–36.9821826
10 Roberge RJ, Leckey R, Spence R, et al. Garlic burns of the breast. Am J Emerg Med 1997;15:548.9270405
11 Mennella JA, Beauchamp GK. Maternal diet alters the sensory qualities of human milk and the nursling's behavior. Pediatrics 1991;88:737–44.1896276
12 Scheffler L, Sauermann Y, Zeh G, et al. Detection of volatile metabolites of garlic in human breast milk. Metabolites 2016;6:E18.27275838
13 Scheffler L, Sharapa C, Buettner A. Quantification of volatile metabolites derived from garlic in human breast milk. Food Chem 2019;274:603–10.30372984
14 Lust KD, Brown JE, Thomas W. Maternal intake of cruciferous vegetables and other foods and colic symptoms in exclusively breast-fed infants. J Am Diet Assoc 1996;96:46–8.8537569
15 Mennella JA, Beauchamp GK. The effects of repeated exposure to garlic-flavored milk on the nursling's behavior. Pediatr Res 1993;34:805–8.8108198
16 Sholapurkar ML. 'Lactare' for improving lactation. Indian Pract 1986;39:1023–6.
17 Beauchamp GK, Mennella JA. Early flavor learning and its impact on later feeding behavior. J Pediatr Gastroenterol Nutr 2009;48 (Suppl. 1):S25–30.19214055

## Substance Identification

### Substance Name

Garlic

### Scientific Name

Allium sativum

### CAS Registry Number

8008-99-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Galactogogues

Phytotherapy

Plants, Medicinal